# Atracurium

CASRN: 64228-79-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of atracurium during breastfeeding. Because it is short acting, highly polar and poorly absorbed orally, it is not likely to reach the breastmilk in high concentration or to reach the bloodstream of the infant.[1,2] When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure. Consider using an atracurium product that has no benzyl alcohol preservative.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Cisatracurium, Rocuronium

### References

1 Spigset O. (1994). Anaesthetic agents and excretion in breast milk. Acta Anaesthesiol Scand.
2 Dalal PG, Bosak J, Berlin C. (2014). Safety of the breast-feeding infant after maternal anesthesia. Paediatr Anaesth.

## Substance Identification

### Substance Name

Atracurium

### CAS Registry Number

64228-81-5; 64228-79-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Muscle Relaxants

Neuromuscular Nondepolarizing Agents